# Dimethicone

CASRN: 9006-65-9

## Drug Levels and Effects

### Summary of Use during Lactation

Although no data are available on the use of dimethicone during breastfeeding, it is not absorbed orally. Therefore, it cannot be transferred to breastmilk. It is also used safely given directly to infants. No special precautions are required.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Dimethicone

### CAS Registry Number

9006-65-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Gastrointestinal Drugs

Antifoaming Agents